# Elosulfase Alfa

CASRN: 9025-60-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of elosulfase alfa during breastfeeding. Because it is a large protein molecule with a molecular weight of about 55,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. If elosulfase alfa is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, elosulfase alfa should be used with infant careful monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Elosulfase Alfa

### CAS Registry Number

9025-60-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy

Chondroitinsulfatases